# Bromhexine

CASRN: 3572-43-8

## Drug Levels and Effects

### Summary of Use during Lactation

Bromhexine is not approved for marketing in the United States by the U.S. Food and Drug Administration but is available in other countries. No information is available on the use of bromhexine during breastfeeding. Because it is about 95% protein bound, the amounts in milk are likely to be low. If a mother requires bromhexine, it is not a reason to discontinue breastfeeding; however, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Guaifenesin

## Substance Identification

### Substance Name

Bromhexine

### CAS Registry Number

3572-43-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Expectorants